# Daprodustat

CASRN: 960539-70-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of daprodustat during breastfeeding. Because of relatively high protein binding, the amount in milk is likely to be low. The manufacturer recommends that breastfeeding be discontinued during daprodustat therapy and for one week after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Daprodustat

### CAS Registry Number

960539-70-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzyme Inhibitors

Prolyl-Hydroxylase Inhibitors